# Oxybutinyn

CASRN: 5633-20-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of oxybutynin during breastfeeding. Long-term use of oxybutynin might reduce milk production or milk letdown, but a single dose is not likely to interfere with breastfeeding. During long-term use, observe for signs of decreased lactation (e.g., insatiety, poor weight gain).

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Anticholinergics can inhibit lactation in animals, apparently by inhibiting growth hormone and oxytocin secretion.[1-5] Anticholinergic drugs can also reduce serum prolactin in nonnursing women.[6] The prolactin level in a mother with established lactation may not affect her ability to breastfeed. The manufacturer reports that cases of lactation suppression have been reported with some oxybutynin (immediate-release) formulations in postmarketing surveillance.[7]

### References

1 Aaron DK, Ely DG, Deweese WP, et al. (1997). Reducing milk production in ewes at weaning using restricted feeding and methscopolamine bromide. J Anim Sci.
2 Powell MR, Keisler DH. (1995). A potential strategy for decreasing milk production in the ewe at weaning using a growth hormone release blocker. J Anim Sci.
3 Daniel JA, Thomas MG, Powell MR, et al. (1997). Methscopolamine bromide blocks hypothalmic-stimulated release of growth hormone in ewes. J Anim Sci.
4 Bizzarro A, Iannucci F, Tolino A, et al. (1980). Inhibiting effect of atropine on prolactin blood levels after stimulation with TRH. Clin Exp Obstet Gynecol.
5 Svennersten K, Nelson L, Juvnäs-Moberg K. (1992). Atropinization decreases oxytocin secretion in dairy cows. Acta Physiol Scand.
6 Masala A, Alagna S, Devilla L, et al. (1982). Muscarinic receptor blockade by pirenzepine: Effect on prolactin secretion in man. J Endocrinol Invest.
7 Ditropan XL package insert. Janssen Pharmaceutical, Inc., Titusville, NJ. August, 2017.

## Substance Identification

### Substance Name

Oxybutinyn

### CAS Registry Number

5633-20-5

### Drug Class

Breast Feeding

Lactation

Muscarinic Antagonists

Parasympatholytics